# Lubiprostone

CASRN: 136790-76-6; 333963-40-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of lubiprostone during breastfeeding. The manufacturer reports that the drug and its metabolite are undetectable in rat milk and would not be expected to cause any adverse effects in a breastfed infant. Monitor the breastfed infant for diarrhea.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Linaclotide, Plecanatide, Prucalopride, Psyllium, Tenapanor

## Substance Identification

### Substance Name

Lubiprostone

### CAS Registry Number

136790-76-6 333963-40-9

### Drug Class

Breast Feeding

Lactation

Chloride Channel Agonists

Gastrointestinal Agents

Membrane Transport Modulators

Laxatives